# Nirmatrelvir

CASRN: 2628280-40-8

## Drug Levels and Effects

### Summary of Use during Lactation

Nirmatrelvir is given in combination with ritonavir, which enhances its bioavailability. The concentration of nirmatrelvir in breastmilk is low. Ritonavir is excreted into milk in measurable concentrations and low levels can be found in the blood of some breastfed infants. No adverse reactions in breastfed infants have been reported. For more information, refer to the LactMed record on ritonavir. Because of the poor oral bioavailability of nirmatrelvir and small amounts of both drugs in milk, this combination is unlikely to adversely affect the nursing infant.[1,2]

### Drug Levels

Maternal Levels. Eight women who were taking nirmatrelvir-ritonavir and had donated milk samples to a breastmilk repository had their milk analyzed for nirmatrelvir. All were taking a nirmatrelvir dose of 300 mg twice daily and reported taking milk samples at 0, 1, 2, 4, 6, 8, 10, and 12 hours after a dose. The peak nirmatrelvir concentration in milk occurred at 4 hours after the dose was 1107 mcg/L and the average concentration was 729 mcg/L. This translated into a daily infant dose of 0.108 mg/kg or a relative infant dose of 1.4%.[3]

Eight healthy lactating women who were at least 12 weeks postpartum were administered 3 oral doses of 300 mg of nirmatrelvir and 100 mg of ritonavir every 12 hours. The peak nirmatrelvir concentration of 1.904 ng/L occurred at 3.22 hours and its mean half-life in breastmilk was 4.4 hours. The mean daily amounts of nirmatrelvir and ritonavir recovered in breastmilk were 0.752 mg and 0.027 mg, respectively, representing 0.13% and 0.014% of the corresponding administered daily maternal doses (unadjusted for weight). The estimated daily infant dosages (assuming average milk consumption of 150 mL/kg/day), were 0.16 mg/kg and 0.006 mg/kg or 1.8% and 0.19% of the maternal dose, respectively, for nirmatrelvir and ritonavir.[4]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

In a cross-sectional study of women who had COVID-19 and received nirmatrelvir in combination ritonavir, two women breastfed their infants. No adverse effects were reported in the infants.[5]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Remdesevir

### References

1 Chourasia P, Maringanti BS, Edwards-Fligner M, et al. Paxlovid (nirmatrelvir and ritonavir) use in pregnant and lactating woman: Current evidence and practice guidelines-a scoping review. Vaccines (Basel) 2023;11:107.36679952
2 Anderson PO. COVID-19 drugs and breastfeeding update. Breastfeed Med 2022;17:377–9.35384717
3 Dai J, Fuquay T, Huseman S, et al. Low nirmatrelvir and ritonavir exposure through breastmilk: Analyzing milk concentrations and infant risk. Clin Pharmacol Ther 2024;116:1217–21.38923506
4 Gerhart J, Cheruvu N, Pelletier K, et al. A phase 1 multiple-dose, open-label, pharmacokinetic study of nirmatrelvir/ritonavir in healthy lactating women. Clin Transl Sci 2026;19:e70552.42012328
5 Lin CY, Cassidy AG, Li L, et al. Nirmatrelvir-ritonavir (Paxlovid) for mild coronavirus disease 2019 (COVID-19) in pregnancy and lactation. Obstet Gynecol 2023;141:957–60.36928334

## Substance Identification

### Substance Name

Nirmatrelvir

### CAS Registry Number

2628280-40-8

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antiviral Agents

Protease Inhibitors